# Xanomeline and Trospium

CASRN: 131986-45-3; 47608-32-2

SID: 388765364; 433990217

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of xanomeline or trospium during breastfeeding. Trospium is unlikely to enter milk because it is a charged molecule. If a mother requires xanomeline and trospium, it is not a reason to discontinue breastfeeding. Monitor the infant for vomiting, diarrhea, abnormal movements and adequate weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Xanomeline and Trospium

### CAS Registry Number

131986-45-3; 47608-32-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Parasympathomimetics

Psychotropic Drugs

Muscarinic Agonists

Parasympatholytics

Muscarinic Antagonists